# Chenodiol

CASRN: 474-25-9

## Drug Levels and Effects

### Summary of Use during Lactation

Chenodiol (chenodeoxycholic acid) and its conjugates are naturally present in human milk, with higher milk levels of chenodiol conjugates in obesity. Chenodiol has not been measured in milk after administration as a drug. Chenodiol in the infant’s gastrointestinal tract enhances intestinal motility. No special precautions are required if mothers are taking chenodiol, but observe the infant for diarrhea.

### Drug Levels

Maternal Levels. In a small study of women who were 2 to 3 days postpartum who were not taking any exogenous bile acids, obese women had bile acid levels in milk that were about equal to those in plasma, unlike women of normal weight who had milk levels of about 10% of plasma levels. Chenodiol conjugate levels were higher in the milk of obese mothers than normal-weight mothers.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Chenodiol acts directly on enterochromaffin cells in the gastrointestinal tract to stimulate 5-hydroxytryptamine secretion, which regulates gastrointestinal motility. Chenodiol stool levels were higher in breastfed infants with increased defecation frequency than in infants with normal or lower frequency.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ursodiol

### References

1 Marousez L, Descat A, Kouach M, et al. Maternal obesity increases breast milk bile acid levels. J Clin Endocrinol Metab 2026;111:e1116–e23.41061665
2 Shan Z, He C, Yang Q, et al. Chenodeoxycholic acid activates the TGR5/TRPA1-5-HT pathway to regulate intestinal motility in breastfed infants and mouse models. Transl Pediatr 2025;14:1213–29.40688229

## Substance Identification

### Substance Name

Chenodiol

### CAS Registry Number

474-25-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Bile Acids and Salts

Cholagogues and Choleretics

Cholic Acids

Gastrointestinal Agents